# Adefovir

CASRN: 106941-25-7

## Drug Levels and Effects

### Summary of Use during Lactation

Adefovir has not been studied in nursing mothers being treated for hepatitis B infection. An alternate drug may be preferred, especially while nursing a newborn or preterm infant.

No differences exist in infection rates between breastfed and formula-fed infants born to hepatitis B-infected women, as long as the infant receives hepatitis B immune globulin and hepatitis B vaccine at birth. Mothers with hepatitis B are encouraged to breastfeed their infants after their infants receive these preventative measures.[1,2]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Hepatitis B) Interferon Alfa, Lamivudine, Tenofovir

### References

1 Visvanathan K, Dusheiko G, Giles M, et al. (2016). Managing HBV in pregnancy. Prevention, prophylaxis, treatment and follow-up: Position paper produced by Australian, UK and New Zealand key opinion leaders. Gut.
2 Dionne-Odom J, Tita AT, Silverman NS. (2016). #38: Hepatitis B in pregnancy screening, treatment, and prevention of vertical transmission. Am J Obstet Gynecol.

## Substance Identification

### Substance Name

Adefovir

### CAS Registry Number

106941-25-7

### Drug Class

Breast Feeding

Lactation

Antiviral Agents

Reverse Transcriptase Inhibitors